# Entrectinib

CASRN: 1108743-60-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of entrectinib during breastfeeding. Because entrectinib and its active metabolite are >99% bound to plasma proteins, the amount in milk is likely to be low. However, because of its potential toxicity in the breastfed infant, the manufacturer recommends that breastfeeding be discontinued during entrectinib therapy and for 7 days after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Entrectinib

### CAS Registry Number

1108743-60-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Janus Kinase Inhibitors

Protein Kinase Inhibitors

Tyrosine Kinase Inhibitors